# Nepafenac

CASRN: 78281-72-8

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the clinical use of nepafenac during breastfeeding. Maternal use of nepafenac eye drops would not be expected to cause any adverse effects in breastfed infants. To substantially diminish the amount of drug that reaches the breastmilk after using eye drops, place pressure over the tear duct by the corner of the eye for 1 minute or more, then remove the excess solution with an absorbent tissue.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

(Ophthalmic) Ketorolac

## Substance Identification

### Substance Name

Nepafenac

### CAS Registry Number

78281-72-8

### Drug Class

Breast Feeding

Lactation

Milk, Human

Analgesic Agents

Anti-inflammatory Agents, Nonsteroidal